# Midazolam

CASRN: 59467-70-8

## Drug Levels and Effects

### Summary of Use during Lactation

The small amounts of midazolam excreted into breastmilk would not be expected to cause adverse effects in most breastfed infants. A safety scoring system finds midazolam acceptable to use during breastfeeding.[1] Two expert panels advocates waiting for at least 4 hours after a single intravenous dose of midazolam (e.g., for endoscopy) before resuming nursing.[2,3] With a newborn or preterm infant a cautious approach would be to wait a period of 6 to 8 hours before resuming nursing. After general anesthesia, breastfeeding can resume as soon as the mother has recovered sufficiently from general anesthesia to nurse.[4,5] When a combination of anesthetic agents is used for a procedure, follow the recommendations for the most problematic medication used during the procedure. With prolonged use (days) of intravenous therapy, an active metabolite can accumulate in the mother and might affect the infant, but data in breastfeeding are lacking. Monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Midazolam is about 36% bioavailable orally in adults. It is metabolized to 1-hydroxymidazolam (60 to 70%) and 4-hydroxymidazolam (5%) which are about equipotent to midazolam. The half-life of 1-hydroxymidazolam is about 12 hours in adults and can accumulate with prolonged or repeated doses or in renal impairment.

Maternal Levels. Twelve mothers were given a total of 30 doses of oral midazolam 15 mg for sleep in the first 5 days postpartum if they requested it. In 11 of the mothers, midazolam was unmeasurable (<3 mcg/L) in breastmilk 7 hours after the dose. One of the mothers accidentally took a second tablet (30 mg total) on one occasion and had a 7-hour milk level of 9 mcg/L. No accumulation occurred with repeated nightly doses in any of the mothers. Two additional women who were 2 to 3 months postpartum had hourly milk sampling after a single 15 mg dose. Peak milk levels of both the drug and metabolite occurred at 1 and 2 hours after the dose in the 2 patients. Peak milk levels of midazolam plus 1-hydroxymidazolam were about 13 mcg/L and the average milk level over the 7-hour period was 6.7 mcg/L.[6] Using these values, an infant exclusively nursing for 7 hours after a dose would receive about 0.3 mcg of the drug plus metabolite.

A mother undergoing surgery received a single 6 mg dose of midazolam intravenously for anesthesia induction. Breastmilk concentration of midazolam was 25 mcg/L at 30 minutes after the dose, 12 mcg/L at 1 hour after the dose and 7 mcg/L at 2 hours after the dose. From 4 hours onward the drug was unmeasurable (<5 mcg/L). Hydroxymidazolam was not measured.[7]

Five women who were 6 to 15 weeks postpartum were given a single dose of 2 mg of midazolam intravenously before undergoing general anesthesia with propofol and fentanyl. Several milk samples were collected between 5 and 24 hours after the injection from each woman. The authors estimated that the infants would receive an average of 0.016 mcg/kg in the 24 hours after a single dose of midazolam. This corresponds to 0.06% of the maternal weight-adjusted dosage. Hydroxymidazolam was not measured. The authors concluded that this amount of midazolam in milk is unlikely to affect a healthy, term infant.[8,9] The infants of mothers not undergoing a surgical procedure might receive a greater dose of midazolam in breastmilk, but it would be unlikely to be a large dose.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a telephone follow-up study, 124 mothers who took a benzodiazepine while nursing reported whether their infants had any signs of sedation. Nineteen mothers took midazolam (presumably orally) while breastfeeding and none reported sedation in her infant.[10]

### Effects on Lactation and Breastmilk

Five women who were 6 to 15 weeks postpartum were given single doses of 2 mg of midazolam and 2.5 mg/kg of propofol intravenously before undergoing general anesthesia. The women’s milk output following the surgical procedure was less than half of the normal milk output of nursing mothers. The authors speculated that milk volume might be reduced postoperatively because of perioperative fluid restriction and volume losses, as well as stress-induced inhibition of milk production.[8]

### Alternate Drugs to Consider

(Intravenous Sedation) Dexmedetomidine, Etomidate, Methohexital, Propofol; (Oral for Sleep) Zaleplon, Zolpidem

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e26.30601177
2 Shergill AK, Ben-Menachem T, Chandrasekhara V, . Guidelines for endoscopy in pregnant and lactating women. Gastrointest Endosc 2012;76:18-24.22579258
3 Vargo JJ, Delegge MH, Feld AD, . Multisociety sedation curriculum for gastrointestinal endoscopy. Gastroenterology 2012;143:e18-41.
4 Reece-Stremtan S, Campos M, Kokajko L, . ABM Clinical Protocol #15: Analgesia and anesthesia for the breastfeeding mother, revised 2017. Breastfeed Med 2017;12:500-6.29624435
5 Mitchell J, Jones W, Morris S, . Guidelines for anaesthesia and sedation for patients who are breastfeeding: Guidelines from the Association of Anaesthetists. Anaesthesia 2026;81:685-701.41532178
6 Matheson I, Lunde PKM, Bredesen JE. Midazolam and nitrazepam in the maternity ward: Milk concentrations and clinical effects. Br J Clin Pharmacol 1990;30:787-93.2288825
7 Koitabashi T, Satoh N, Takino Y. Intravenous midazolam passage into breast milk. J Anesth 1997;11:242-3.28921122
8 Nitsun M, Szokol JW, Saleh HJ, . Pharmacokinetics of midazolam, propofol, and fentanyl transfer to human breast milk. Clin Pharmacol Ther 2006;79:549-57.16765143
9 Avram MJ, Nitsun M, Szokol JW, . Midazolam elimination in human breast milk. Clin Pharmacol Ther 2006;79 (Suppl. S):P7. doi:10.1016/j.clpt.2005.12.021
10 Kelly LE, Poon S, Madadi P, . Neonatal benzodiazepines exposure during breastfeeding. J Pediatr 2012;161:448-51.22504099

## Substance Identification

### Substance Name

Midazolam

### CAS Registry Number

59467-70-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants

Hypnotics and Sedatives

Anti-Anxiety Agents

Benzodiazepines

Anesthetics, Intravenous